# Velpatasvir

CASRN: 1377049-84-7

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that typical doses of velpatasvir produce low levels in milk and would not be expected to cause any adverse effects in breastfed infants. If velpatasvir is used alone or in combination with sofosbuvir (Epclusa) or sofosbuvir and voxilaprevir (Vosevi), it is not a reason to discontinue breastfeeding.

Hepatitis C is not transmitted through breastmilk, and breastmilk has been shown to inactivate hepatitis C virus (HCV).[1-4] However, the Centers for Disease Control recommends that mothers with HCV infection should consider abstaining from breastfeeding if their nipples are cracked or bleeding. It is not clear if this warning would apply to mothers who are being treated for hepatitis C.

Infants born to mothers with HCV infection should be tested for HCV infection; because maternal antibody is present for the first 18 months of life and before the infant mounts an immunologic response, nucleic acid testing is recommended.[1,4]

### Drug Levels

Maternal Levels. Four mothers with hepatitis C infections began taking velpatasvir 100 mg in combination with sofosbuvir 400 mg orally once daily shortly after delivery. Paired samples of maternal serum and breastmilk were collected within the first 24 hours after commencing the drug regimen and at up to 6 days after initiation. Samples were collected from 1 to 25.6 hours after a dose. The median velpatasvir milk concentration was 26.8 mcg/L (range 6.6 to 59.7 mcg/L) with a median infant daily dosage of 4 mcg/kg and a relative infant dose of 0.14%.[5] Because of the random collection and the reporting method, the true values may vary somewhat from these numbers.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Hepatitis C) Interferon Alfa, Interferon Alfacon-1, Peginterferon Alfa, Sofosbuvir

### References

1 Cottrell EB, Chou R, Wasson N, et al. Reducing risk for mother-to-infant transmission of hepatitis C virus: A systematic review for the U.S. Preventive Services Task Force. Ann Intern Med 2013;158:109–13.23437438
2 Pfaender S, Heyden J, Friesland M, et al. Inactivation of hepatitis C virus infectivity by human breast milk. J Infect Dis 2013;208:1943–52.24068703
3 Tovo PA, Calitri C, Scolfaro C, et al. Vertically acquired hepatitis C virus infection: Correlates of transmission and disease progression. World J Gastroenterol 2016;22:1382–92.26819507
4 Workowski KA, Bachmann LH, Chan PA, et al. Sexually transmitted infections treatment guidelines, 2021. MMWR Recomm Rep 2021;70:1–187.34292926
5 Chappell CA, Brooks KM, Kiser JJ, et al. Sofosbuvir/velpatasvir concentrations in the breastmilk of postpartum women with opioid use disorder receiving treatment for hepatitis C virus: A pharmacokinetic study. Clin Infect Dis 2026;82:993–6.40795873

## Substance Identification

### Substance Name

Velpatasvir

### CAS Registry Number

1377049-84-7

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antiviral Agents

NS5A Inhibitors